# Sulopenem and Probenecid

CASRN: 120788-07-0; 57-66-9

SID: 403232805; 403392154

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sulopenem during breastfeeding. Its excretion into breastmilk is likely similar to that of imipenem and meropenem, which produce low levels in milk that are not expected to cause adverse effects in breastfed infants. Limited information indicates that maternal doses of probenecid up to 2 grams daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush has been reported with beta-lactams, but these effects have not been adequately evaluated. Sulopenem-probenecid is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. A woman was given probenecid 500 mg orally 4 times daily to enhance cephalexin serum levels. After 16 days of therapy at 4.5 weeks postpartum, 12 samples of breastmilk (6 pairs of fore- and hindmilk) were collected over a 16-hour period. The average concentration of probenecid in milk was 964 mcg/L, corresponding to an infant dosage of 145 mcg/kg daily and 0.7% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ilett KF, Hackett LP, Ingle B, et al. Transfer of probenecid and cephalexin into breast milk. Ann Pharmacother 2006;40:986-9.16551765

## Substance Identification

### Substance Name

Sulopenem and Probenecid

### CAS Registry Number

120788-07-0; 57-66-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Carbapenems